# Datopotamab Deruxtecan

CASRN: 2238831-60-0

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of datopotamab deruxtecan during breastfeeding. Because datopotamab is a large protein molecule, the amount in milk is likely to be very low.[1] It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2] However, datopotamab is conjugated with the small-molecule topoisomerase I inhibitor, deruxtecan, which might be excreted into milk and absorbed by the infant. Because of the potential for serious adverse reactions in the breastfed infant, the manufacturer recommends that breastfeeding be discontinued during therapy and for 1 month after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Datopotamab Deruxtecan

### CAS Registry Number

2238831-60-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal, Humanized

Antineoplastic Agents

Topoisomerase I Inhibitors